# Rotavirus Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

Rotavirus vaccines are used only in infants and are not indicated for use in women of childbearing age. Breastfeeding protects infants against acute gastroenteritis caused by rotavirus.[1,2] However, breastfeeding can reduce the immune response of an infant to rotavirus vaccines in low- and middle-income countries.[3-9] Breastfeeding might also reduce viral shedding in the stool by the vaccinated infants.[6] Maternal antibodies are probably an important cause of the lower response rate, but lactadherin, a milk glycoprotein, and infant genetics may also be factors.[8-11] The extent of the effect depends on the maternal anti-rotavirus antibody titer in breastmilk with higher titers found in less developed areas.[12-16] Withholding breastfeeding for up to 2 hours before and after vaccine administration has been recommended to minimize the interference.[12,17,18] However, other studies found that withholding breastfeeding for either one hour before and after immunization,[19,20] or for 30 minutes before vaccination had no effect on seroconversion.[21] Reviews have concluded that withholding of breastfeeding at the time of vaccination has no effect on seroconversion of infants.[8,22] A new vaccine strain (RV3-BB) has been developed that is not as susceptible to maternal milk antibodies and provides good protection by 18 weeks of age.[23]

A European study found no difference in rotavirus infection rates during the first season between infants who were breastfed and formula-fed when they received rotavirus vaccination. In the second season, protection against infection was slightly less in breastfed infants.[4] A German study found that exclusive or partial breastfeeding increased the risk of breakthrough infection fourfold.[5] A study in Indonesia found that rotavirus vaccine was cost-effective for the health system, even with improved breastfeeding rates.[24]

Studies have found that breastfeeding decreases the risk of intestinal intussusception caused by rotavirus vaccine by about half.[25,26]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A subset of 300 infants in a multicenter European rotavirus efficacy trial had antirotavirus IgA titers measured 1 to 2 months after the second rotavirus dose (Rotarix - GSK). Breast-fed infants had an 85.5% conversion rate compared with 89.2% rate in exclusively formula-fed infants, which was not statistically different. The serum antirotavirus IgA concentrations were 185.8 units/mL and 231.5 units/mL in the breastfed and exclusively formula-fed infants, respectively.[4]

Two hundred fifty breastfed infants were randomized to receive their routine rotavirus vaccination (Rotarix) with either unrestricted breastfeeding or withholding breastfeeding from 1 hour before to 1 hour after the vaccination. No difference were found in the rate of seroconversion between the two groups of infants.[20]

Four hundred infants in India were randomized to either be breastfed before receiving rotavirus vaccine (Rotarix) or to not be breastfed within 30 minutes of their vaccination. Vaccinations were given at 6 to 7 weeks and at 10 to 14 weeks of age. Of the 388 infants with evaluable information, no difference was found in the seroconversion rate between the two groups.[21]

Among 45 breastfed (at least 4 times daily) Nicaraguan infants who were given a rotavirus vaccination (Rotateq-MSD), 31 infants seroconverted and 14 infants did not. The seroconversion failures were mostly in infants who had high preimmunization IgA levels and whose mothers had high serum IgG antibody levels against rotavirus. No correlation was found between breastmilk IgA or neutralizing antibodies and seroconversion, although the sample size was small.[27]

In a monovalent G1P[8] rotavirus vaccine (Rotarix) trial in Bangladesh, rotavirus-specific plasma IgA antibody seroconversion rates were higher among infants of maternal non-secretors of antibodies (39%) compared to mothers who secreted anti-rotavirus antibodies (23%). Maternal secretor status was a significant predictor of infant response to the vaccine.[16]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Plenge-Bönig A, Soto-Ramírez N, Karmaus W, et al. Breastfeeding protects against acute gastroenteritis due to rotavirus in infants. Eur J Pediatr 2010;169:1471-6.20617343
2 Das S, Sahoo GC, Das P, et al. Evaluating the impact of breastfeeding on rotavirus antigenemia and disease severity in Indian children. PLoS One 2016;11:e0146243.26828823
3 Goveia MG, Dinubile MJ, Dallas MJ, et al. Efficacy of pentavalent human-bovine (WC3) reassortant rotavirus vaccine based on breastfeeding frequency. Pediatr Infect Dis J 2008;27:656-8.18520448
4 Vesikari T, Prymula R, Schuster V, et al. Efficacy and immunogenicity of live-attenuated human rotavirus vaccine in breast-fed and formula-fed European infants. Pediatr Infect Dis J 2012;31:509-13.22228235
5 Adlhoch C, Hoehne M, Littmann M, et al. Rotavirus vaccine effectiveness and case-control study on risk factors for breakthrough infections in Germany, 2010-2011. Pediatr Infect Dis J 2013;32:e82-9.23334342
6 Bautista-Marquez A, Velasquez DE, Esparza-Aguilar M, et al. Breastfeeding linked to the reduction of both rotavirus shedding and IgA levels after Rotarix(R) immunization in Mexican infants. Vaccine 2016;34:5284-9.27663670
7 Parker EP, Ramani S, Lopman BA, et al. Causes of impaired oral vaccine efficacy in developing countries. Future Microbiol 2018;13:97-118.29218997
8 Otero CE, Langel SN, Blasi M, et al. Maternal antibody interference contributes to reduced rotavirus vaccine efficacy in developing countries. PLoS Pathog 2020;16:e1009010.33211756
9 Hitchings MDT, Cummings DAT, Grais RF, et al. A mixture model to assess the the immunogenicity of an oral rotavirus vaccine among healthy infants in Niger. Vaccine 2020;38:8161-6.33162202
10 Mwila-Kazimbaya K, García MP, Bosomprah S, et al. Effect of innate antiviral glycoproteins in breast milk on seroconversion to rotavirus vaccine (Rotarix) in children in Lusaka, Zambia. PLoS One 2017;12:e0189351.29284036
11 Pun J, Evans C, Chasekwa B, et al. Associations between histo-blood group antigen status in mother-infant dyads and infant oral rotavirus vaccine immunogenicity in rural Zimbabwe. J Infect Dis 2025;231:e225-e33.39352457
12 Moon SS, Wang Y, Shane AL, et al. Inhibitory effect of breast milk on infectivity of live oral rotavirus vaccines. Pediatr Infect Dis J 2010;29:919-23.20442687
13 Chan J, Nirwati H, Triasih R, et al. Maternal antibodies to rotavirus: Could they interfere with live rotavirus vaccines in developing countries? Vaccine 2011;29:1242-7.21147127
14 Moon SS, Groome MJ, Velasquez DE, et al. Prevaccination rotavirus serum IgG and IgA are associated with lower immunogenicity of live, oral human rotavirus vaccine in South African infants. Clin Infect Dis 2016;62:157-65.26400993
15 Trang NV, Braeckman T, Lernout T, et al. Prevalence of rotavirus antibodies in breast milk and inhibitory effects to rotavirus vaccines. Hum Vaccin Immunother 2014;10:3681-7.25668672
16 Williams FB, Kader A, Colgate ER, et al. Maternal secretor status affects oral rotavirus vaccine response in breastfed infants in Bangladesh. J Infect Dis 2021;224:1147-51.32157282
17 Foster RH, Wagstaff AJ. Tetravalent human-rhesus reassortant rotavirus vaccine: a review of its immunogenicity, tolerability and protective efficacy against paediatric rotavirus gastroenteritis. BioDrugs 1998;9:155-78.18020551
18 Danchin MH, Bines JE, Watts E, et al. Rotavirus specific maternal antibodies and immune response to RV3-BB rotavirus vaccine in central java and yogyakarta, Indonesia. Vaccine 2020;38:3235-42.32160948
19 Ali A, Kazi AM, Cortese MM, et al. Impact of withholding breastfeeding at the time of vaccination on the immunogenicity of oral rotavirus vaccine-a randomized trial. PLoS One 2015;10:e0127622.26035743
20 Groome MJ, Moon SS, Velasquez D, et al. Effect of breastfeeding on immunogenicity of oral live-attenuated human rotavirus vaccine: a randomized trial in HIV-uninfected infants in Soweto, South Africa. Bull World Health Organ 2014;92:238-45.24700991
21 Rongsen-Chandola T, Strand TA, Goyal N, et al. Effect of withholding breastfeeding on the immune response to a live oral rotavirus vaccine in North Indian infants. Vaccine 2014;32 (Suppl 1):A134-9.25091668
22 Mwila K, Chilengi R, Simuyandi M, et al. Contribution of maternal immunity to decreased rotavirus vaccine performance in low and middle income countries. Clin Vaccine Immunol 2017;24:e00405-16.27847365
23 Morgan B, Lyons EA, Handley A, et al. Rotavirus-specific maternal serum antibodies and vaccine responses to RV3-BB rotavirus vaccine administered in a neonatal or infant schedule in malawi. Viruses 2024;16:1488.39339964
24 Suwantika AA, Postma MJ. Effect of breastfeeding promotion interventions on cost-effectiveness of rotavirus immunization in Indonesia. BMC Public Health 2013;13:1106.24289227
25 Oberle D, Hoffelner M, Pavel J, et al. Retrospective multicenter matched case-control study on the risk factors for intussusception in infants less than 1 year of age with a special focus on rotavirus vaccines - the German Intussusception Study. Hum Vaccin Immunother 2020;16:2481-94.32271647
26 Restivo V, Costantino C, Giorgianni G, et al. Case-control study on intestinal intussusception: Implications for anti-rotavirus vaccination. Expert Rev Vaccines 2018;17:1135-41.30407079
27 Becker-Dreps S, Vilchez S, Velasquez D, et al. Rotavirus-specific IgG antibodies from mothers' serum may inhibit infant immune responses to the pentavalent rotavirus vaccine. Pediatr Infect Dis J 2015;34:115-6.25741808

## Substance Identification

### Substance Name

Rotavirus Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines

Viral Vaccines